# Mosunetuzumab

CASRN: 1905409-39-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of mosunetuzumab during breastfeeding. Because mosunetuzumab is a large protein molecule with a molecular weight of 146,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] The manufacturer recommends that breastfeeding be discontinued during mosunetuzumab therapy and for 3 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Mosunetuzumab

### CAS Registry Number

1905409-39-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Monoclonal Antibodies, Humanized

Antineoplastic Agents